# Smallpox Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

Worldwide, three vaccines are available for smallpox, known as MVA-BN, ACAM-2000 and LC16. Only MVA-BN (Jynneos) and ACAM-2000 are available in the United States. The MVA-BN vaccine does not replicate and behaves like a non-live vaccine. The ACAM-2000 vaccine is live and is contraindicated in breastfeeding. No information is available on the LC16 (minimally replicating) vaccine during breastfeeding. The US Centers for Disease Control and Prevention and the World Health Organization state that the MVA-BN vaccine can be offered to breastfeeding women who are otherwise eligible and breastfeeding need not be discontinued after vaccination. The risks and benefits of the vaccine should be discussed with the patient using shared decision-making.[1-3]

### Drug Levels

Maternal Levels. Smallpox vaccine ACAM-2000 has not been studied in lactating women. Live vaccinia virus can be inadvertently transmitted from a lactating mother to her breastfed infant. Infants are at high risk of developing serious complications from live vaccinia smallpox vaccination.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One 5-month-old breastfed infant acquired a vaccinia lesion on her upper lip, tongue and cheek after her mother developed vaccinia lesions on both areolas. The mother's infection apparently originated from the father who had been vaccinated about 10 days prior with a live vaccine (exact type not stated). The exact mechanism of transmission was not apparent.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Monkeypox Vaccine

### References

1 Centers for Disease Control and Prevention. Mpox clinical care and treatment during pregnancy. January 30, 2025. https://www.cdc.gov/mpox/hcp/clinical-care/pregnancy.html
2 World Health Organization. Smallpox and mpox (orthopoxviruses): WHO position paper, August 2024. WHO Weekly Epidemiological Record 2024;99:429–56. https://www.who.int/publications/i/item/who-wer-9934-429-456
3 Hombach J., Lewis R., Holten J. V., et al. Breastfeeding mothers in DR Congo should have access to the mpox vaccine. Lancet Glob Health 2024;12:e1932.39577965
4 Acambis Inc. ACAM2000 (Smallpox [Vaccinia] Vaccine, Live) package insert. 2007.
5 Garde V, Harper D, Fairchok MP. Tertiary contact vaccinia in a breastfeeding infant. JAMA 2004;291:725–7.14871916

## Substance Identification

### Substance Name

Smallpox Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines